# Bulevirtide

CASRN: 2012558-47-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of bulevirtide during breastfeeding. Because bulevirtide is more than 99% bound to plasma proteins, has liver tropism, and high specificity for sodium taurocholate co-transporting polypeptide, the amount in milk is likely to be low. It is a peptide that is likely digested in the infant’s gastrointestinal tract, so it is unlikely to reach the clinically important levels in infant serum. If a mother requires bulevirtide, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Bulevirtide

### CAS Registry Number

2012558-47-1

### Drug Class

Breast Feeding

Lactation

Milk, Human